# Heroin

CASRN: 561-27-3

## Drug Levels and Effects

### Summary of Use during Lactation

Heroin (diamorphine) use during breastfeeding has not been systematically studied, but it has long been known that infants exposed via breastmilk can be affected and develop abstinence if breastmilk is discontinued.[1] Heroin use by breastfeeding mothers can also prevent symptoms of withdrawal in their heroin-exposed breastfed infants.[2,3] Withdrawal symptoms can occur in breastfed infants when maternal administration of an opioid analgesic is stopped, or when breastfeeding is stopped. Deaths have been reported in breastfed infants. Use of heroin as a street drug by nursing mothers carries the risk of breastmilk contamination with a variety of possible chemical contaminants that may be present in illicit heroin. Heroin use by a nursing mother is generally considered to be a contraindication to breastfeeding. Mothers who discontinue heroin use and begin methadone, naltrexone or sublingual buprenorphine maintenance therapy should be encouraged to breastfeed with ongoing medical support.[4]

Heroin (diamorphine) by the intrathecal or epidural route is recommended for analgesia during cesarean section and for postoperative analgesia in the United Kingdom where a standardized pharmaceutical product is commercially available.[5] However, no research on the effect on the breastfed infant or lactation has been published with this use.

### Drug Levels

Heroin (diacetylmorphine) is rapidly metabolized in the body to 6-monoacetylmorphine, which is about 6 times more potent than morphine; 6-monoacetylmorphine is further metabolized to morphine. All three drugs contribute to heroin's effects.

Maternal Levels. One heroin-using mother on methadone maintenance treatment had a low concentration of morphine (7 mcg/L) in her breastmilk. The presence of morphine possibly indicated recent use of heroin.[6]

Infant Levels. A 2-month-old breastfed (extent not stated) infant whose mother admitted to using heroin two days prior was admitted to the hospital. The infant's stomach contents and blood were positive for opiates, but results were not quantified.[7]

A 1-month-old infant was brought to the emergency room with respiratory distress. Free and conjugated morphine totaling of 312 mcg/L and codeine 26 mcg/L were found in the infant's urine. Hair analysis of the parents and infant were all positive for morphine, codeine and the heroin metabolite 6-monoacetylmorphine as well as cocaine and its metabolite benzoylecgonine. The authors believed that the infant had been exposed to heroin and cocaine chronically via the placenta, breastmilk and inhalation of smoked heroin and cocaine.[8]

### Effects in Breastfed Infants

A paper from 1915 reported a breastfed newborn infant whose mother began using heroin as a snuff for abdominal pain. She continued to use the snuff and became dependent. Her breastfed (extent not stated, but probably nearly exclusive) infant slept excessively, but when awake it would curl up with abdominal cramps and cry continuously until breastfed. When the mother was deprived of the drug, the infant would yawn, sneeze, sweat, cry and have cramps in addition to occasional diarrhea. The mother was arrested, and the infant was examined by the prison physician. Upon examination, the infant was "pale and flabby looking." with almost colorless lips and pinpoint pupils that did not react to light. The infant slept for most of the day then awoke with sweating and cramps. The infant was treated with camphorated tincture of opium (paregoric) and tincture of nux vomica (containing strychnine) three times daily. After 4 days of therapy, the infant reportedly appeared more cheerful and had no more cramps.[1]

A 2-month-old breastfed (extent not stated) infant presented to the hospital with irritability and a high-pitched cry. He developed hypertonia and opisthotonos and had an increased respiration and heart rate. Laboratory tests revealed a severe metabolic alkalosis. His mother admitted to using heroin 2 days prior to admission for the first time since delivery. The infant's stomach contents and blood were positive for opiates as was the breastmilk and urine of the mother. The infant developed bilateral pulmonary infiltrates and had two positive sweat tests, indicating cystic fibrosis. The authors attributed the infant's metabolic alkalosis to the profuse sweating from heroin withdrawal in the presence of undiagnosed cystic fibrosis.[7]

An 8-year-old girl was brought to a hospital in Iran by her aunt. The girl's mother had used heroin throughout pregnancy and lactation. She continued to breastfeed the child up to the time of admission to prevent heroin withdrawal. The girl had also not been enrolled in school to avoid signs of withdrawal in the child. Both mother and child were treated with buprenorphine for opiate dependence.[3]

A 1-month-old infant was brought to the emergency room with respiratory distress. Cyanosis, fixed and constricted pupils, muscular hypotony and respiratory failure were found on physical examination. Free and conjugated morphine and codeine were found in the infant's urine. Hair analysis of the infant was positive for morphine, codeine and 6-monoacetylmorphine as well as cocaine and its metabolite benzoylecgonine. The authors believed that the infant had been exposed to heroin and cocaine chronically via the placenta, breastmilk, and inhalation of smoked heroin and cocaine.[8]

A review of 10 years of reports to the European adverse drug reaction database (EudraVigilance) found 3 deaths reported in breastfed infants associated with heroin. Further details of the cases were not reported.[9]

### Effects on Lactation and Breastmilk

Heroin and morphine can increase serum prolactin.[10-12] However, the prolactin level in a mother with established lactation may not affect her ability to breastfeed.

One nursing mother was using heroin as a snuff and had an adequate milk supply. When she switched to using morphine by injection, her milk supply seemed to diminish and she needed to breastfeed more frequently.[1]

The amenorrhea-galactorrhea syndrome with "copious galactorrhea" was reported in 3 heroin-dependent women in their early 20's. Serum prolactin was not measured, but all had hypoestrogenism and low gonadotropin levels.[13]

### Alternate Drugs to Consider

(Analgesia) Acetaminophen, Butorphanol, Fentanyl, Hydromorphone, Ibuprofen, Morphine; (Opiate Dependency) Buprenorphine, Methadone, Naltrexone

### References

1 Lichtenstein PM. Infant drug addicts. N Y Med J 1915;102:905.
2 Godfriend MJ, Shey IA, Klein MD. The effects of maternal narcotic addiction on the newborn. Am J Obstet Gynecol 1956;71:29–36.13282969
3 Eslami-Shahrbabaki M, Barfeh D, Eslami-Shahrbabaki P. Breastfeeding: Neglect or excessive support? A case report of child abuse by a negligent heroin-dependent mother. Addict Health 2015;7:92–5.26322217
4 Harris M, Schiff DM, Saia K, et al. Academy of Breastfeeding Medicine Clinical Protocol #21: Breastfeeding in the setting of substance use and substance use disorder (Revised 2023). Breastfeed Med 2023;18:715–33.37856658
5 National Institute for Health and Clinical Excellence. Caesarean Birth NICE Guideline [NG192]. 2021 https://www.nice.org.uk/guidance/qs32
6 Marchei E, Escuder D, Pallas CR, et al. Simultaneous analysis of frequently used licit and illicit psychoactive drugs in breast milk by liquid chromatography tandem mass spectrometry. J Pharm Biomed Anal 2011;55:309–16.21330091
7 vande Velde S, Verloo P, Van Biervliet S, et al. Heroin withdrawal leads to metabolic alkalosis in an infant with cystic fibrosis. Eur J Pediatr 2007;166:75–6.
8 Joya X, Friguls B, Simo M, et al. Acute heroin intoxication in a baby chronically exposed to cocaine and heroin: A case report. J Med Case Rep 2011;5:288.21729296
9 Heerfordt IM, Gotfredsen DR, Horwitz H, et al. EudraVigilance insights: Suspected adverse drug reactions in infants through breastfeeding. Br J Clin Pharmacol 2025;91:2431–6.40190021
10 Afrasiabi MA, Flomm M, Friedlander H, et al. Endocrine studies in heroin addicts. Psychoneuroendocrinology 1979;4:145–53.230529
11 Spagnolli W, De Venuto G, Mattarei M, et al. Prolactin and thyrotropin pituitary response to thyrotropin releasing hormone in young female heroin addicts. Drug Alcohol Depend 1987;20:247–54.3125030
12 Tolis G, Dent R, Guyda H. Opiates, prolactin, and the dopamine receptor. J Clin Endocrinol Metab 1978;47:200–3.263291
13 Pelosi MA, Sama JC, Caterini H, et al. Galactorrhea-amenorrhea syndrome associated with heroin addiction. Am J Obstet Gynecol 1974;118:966–70.4856399

## Substance Identification

### Substance Name

Heroin

### CAS Registry Number

561-27-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics, Opioid

Narcotics

Street Drugs